# Aminexil

CASRN: 113275-13-1

## Drug Levels and Effects

### Summary of Use during Lactation

No information is available on the clinical use of aminexil during breastfeeding. Maternal use of topical aminexil should pose low risk to older, full-term breastfed infants, but might best be avoided while breastfeeding a preterm or neonatal infant.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Minoxidil

## Substance Identification

### Substance Name

Aminexil

### CAS Registry Number

113275-13-1

### Drug Class

Breast Feeding

Lactation

Milk, Human